# Pyridostigmine

CASRN: 101-26-8

## Drug Levels and Effects

### Summary of Use during Lactation

Because of the low levels of pyridostigmine in breastmilk, amounts ingested by the infant are small and infant serum levels are very low. Pyridostigmine is not expected to cause any adverse effects in breastfed infants. Most mothers with myasthenia gravis are able to nurse successfully with pyridostigmine treatment, but occasionally breastfeeding must be discontinued to avoid excessive fatigue in the mother.

### Drug Levels

Maternal Levels. A woman was taking pyridostigmine 120 mg every 4 to 5 hours for myasthenia gravis during pregnancy. After delivery, she had an undetectable (<100 mcg/L) pyridostigmine level in breastmilk 120 minutes after a 60 mg oral dose.[1]

A mother who was taking pyridostigmine 60 mg 3 times daily (3 mg/kg daily) had milk pyridostigmine levels ranging from 13 to 24 mcg/L at various times during the 8-hour dosage interval at 5 and 35 days postpartum. At 102 days postpartum while taking 40 mg twice daily (2 mg/kg daily), milk pyridostigmine levels ranged from the limit of detection (2 to 5 mcg/L) to 5 mcg/L during a dosage interval. The time of the peak milk level was about 4 hours after a dose. Another mother who was taking pyridostigmine 60 mg 5 times daily (5 mg/kg daily) had milk pyridostigmine levels of 25 and 22 mcg/L at the time of a dose and 2.5 hours after a dose, respectively, at 60 days postpartum. The authors estimated that an exclusively breastfed infant would receive a maximum of 0.1% of the maternal weight-adjusted dosage.[2]

Infant Levels. In an exclusively breastfed 60-day-old infant whose mother was taking pyridostigmine 60 mg 5 times daily (5 mg/kg daily), the drug was not detectable in serum (<2 mcg/L) at the time of a dose or 2.6 hours later.[2]

### Effects in Breastfed Infants

A woman was taking pyridostigmine 120 mg every 4 to 5 hours for myasthenia gravis. Her breastfed (extent not stated) infant reportedly thrived and had no cholinergic side effects.[1]

Two infants whose mothers were taking pyridostigmine 3 and 5 mg/kg daily during pregnancy and lactation were exclusively breastfed. Both infants gained weight and developed normally and had no signs of cholinergic side effects.[2]

### Effects on Lactation and Breastmilk

Relevant published information in nursing mothers was not found as of the revision date. In animals, cholinergic drugs increase oxytocin release,[3] and have variable effects on serum prolactin.[4] The prolactin level in a mother with established lactation may not affect her ability to breastfeed.

In a case series of 69 pregnancies in 65 women with myasthenia gravis over 27 years, 49 patients received pyridostigmine during pregnancy and lactation. Lactation data were available for 33 patients, and 25 of them nursed successfully, although the number of these mothers who were taking pyridostigmine was not given. Nursing was sometimes disrupted to avoid exhaustion in the mother.[5]

### Alternate Drugs to Consider

Neostigmine

### References

1 Skoglund RR, Roberts CC, Huddlestone J. (1978). The role of anti-acetylcholine receptor antibody in neonatal myasthenia gravis. Bull Los Angeles Neurol Soc.
2 Hardell LI, Lindström B, Lönnerholm G, et al. (1982). Pyridostigmine in human breast milk. Br J Clin Pharmacol.
3 Clarke G, Fall CH, Lincoln DW, et al. (1978). Effects of cholinoceptor antagonists on the suckling-induced and experimentally evoked release of oxytocin. Br J Pharmacol.
4 Müller EE, Locatelli V, Cella S, et al. (1983). Prolactin-lowering and -releasing drugs: Mechanisms of action and therapeutic applications. Drugs.
5 Djelmis J, Sostarko M, Mayer D, et al. (2002). Myasthenia gravis in pregnancy: Report on 69 cases. Eur J Obstet Gynecol Reprod Biol.

## Substance Identification

### Substance Name

Pyridostigmine

### CAS Registry Number

101-26-8

### Drug Class

Breast Feeding

Lactation

Milk, Human

Cholinesterase Inhibitors

Parasympathomimetics